# Telbivudine

CASRN: 3424-98-4

## Drug Levels and Effects

### Summary of Use during Lactation

Telbivudine has been discontinued from the US market. It has not been studied in nursing mothers being treated for hepatitis B infection. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

No difference exist in infection rates between breast-fed and formula-fed infants born to hepatitis B-infected women, as long as the infant receives hepatitis B immune globulin and hepatitis B vaccine at birth. Mothers with hepatitis B are encouraged to breastfeed their infants after their infants receive these preventative measures.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis B) Interferon Alfa, Lamivudine, Tenofovir

### References

1 Visvanathan K, Dusheiko G, Giles M, et al. (2016). Managing HBV in pregnancy. Prevention, prophylaxis, treatment and follow-up: Position paper produced by Australian, UK and New Zealand key opinion leaders. Gut.
2 Dionne-Odom J, Tita AT, Silverman NS. (2016). #38: Hepatitis B in pregnancy screening, treatment, and prevention of vertical transmission. Am J Obstet Gynecol.

## Substance Identification

### Substance Name

Telbivudine

### CAS Registry Number

3424-98-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

Nucleic Acid Synthesis Inhibitors